# Resveratrol

CASRN: 501-36-0

## Drug Levels and Effects

### Summary of Use during Lactation

Resveratrol (3,4',5-trans-trihydroxystilbene) is an antioxidant found in numerous plant species and in red wine. Resveratrol has no specific lactation-related uses. In general, it is used to prevent heart disease, cancer, and other diseases associated with aging, although high-quality studies are lacking. Resveratrol appears to be relatively free from adverse reactions. However, no data exist on the excretion of resveratrol into breastmilk or on the safety and efficacy of resveratrol in nursing mothers or infants. Resveratrol supplements usually contain hundreds of times the amounts found in wine or other foods, so their safety during breastfeeding cannot be assured. It is probably best to avoid the use of red wine as a source of resveratrol during breastfeeding. Refer to the LactMed record on Alcohol for details.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Resveratrol

### CAS Registry Number

501-36-0

### Drug Class

Breast Feeding

Lactation

Complementary Therapies